# Iothalamate Sodium I 125

CASRN: 17692-74-9

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of iothalamate sodium I 125 as a kidney function diagnostic agent. No information is available on the use of iothalamate sodium I 125 during breastfeeding. However, the biologic half-life of iothalamate after intravenous administration is 1.5 hours with normal kidney function, so the drug will be almost completely eliminated from the body in 8 hours. This time may be longer in patients with impaired kidney function and in patients who receive the drug by subcutaneous injection.[1] If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[2-4]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at background levels, they may safely resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[5]

### Drug Levels

I 125 is a low-energy pure gamma emitter with a physical half-life of 59.4 days.[6]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Iodohippurate Sodium I 125

### References

1 Turkel C, Fox A. Hints for successful use of subcutaneous Glofil-125. Nephron 1998;78:230.9496747
2 Mountford P, Coakley A. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
3 Chen M, Coakley F, Kaimal A, et al. Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol 2008;112:333-40.18669732
4 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
5 Stabin M, Breitz H. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203
6 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):319-21.

## Substance Identification

### Substance Name

Iothalamate Sodium I 125

### CAS Registry Number

17692-74-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes

Diagnostic Agents